# Sulfadoxine and Pyrimethamine

CASRN: 37338-39-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is little published experience with sulfadoxine during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. The manufacturer states that the combination of sulfadoxine-pyrimethamine is contraindicated for prophylaxis during nursing and in children under 2 months of age. However, some authors have found no contraindication to the use of sulfadoxine-pyrimethamine during breastfeeding.[1,2] It has been suggested that maternal pyrimethamine clearance might be increased during lactation, but data are insufficient to make a definitive conclusion.[3,4]

Sulfadoxine-pyrimethamine prophylaxis of the mother should be discontinued at the first appearance in the infant of jaundice, skin rash, if a significant reduction in the count of any formed blood elements is noted, or upon the occurrence of active bacterial or fungal infections.

### Drug Levels

Maternal Levels. Relevant published information on sulfadoxine was not found as of the revision date.

Pyrimethamine milk levels have been reported to range from 0.2 to 0.26 mcg/L at 6 hours after doses of 25, 50 or 75 mg in 6 women. Milk levels ranged from 0.125 to 0.155 mcg/L 24 hours after the dose and 0.095 to 0.0105 mcg/L at 48 hours.[5,6]

Three women were given a single dose of pyrimethamine 12.5 mg orally 2 to 5 days postpartum. Milk samples were obtained periodically for about 9 days after the dose. Assuming a daily intake of 1 L of milk, the infants would receive 0.14, 0.21 and 0.34 mg in milk over the study period. These values equate to an average of 46% of the maternal weight-adjusted dosage.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Administration of pyrimethamine to mothers of 26 predominantly breastfed infants 2 to 6 months old who were infected with malaria was curative in the infants.[6] The regimen consisted of 75 mg followed by a subsequent dose of 50-75 mg 4 to 7 days later. The efficacy apparently is related to breastfeeding habits, because infants in another tribal group who breastfed their infants less extensively were not protected.[5] An additional case report indicates that a maternal dose of 75 mg orally followed by 25 mg weekly cured malaria in her infant and protected her breastfed infant against becoming infected with malaria for 6 months.[7] No adverse effects were reported in any of the infants.

A study of women with HIV infection being treated for presumptive malaria included 12 nursing mothers who were taking the sulfadoxine-pyrimethamine combination. The drug combination appeared to reduce breastmilk viral load less than chloroquine treatment. No mention was made of the effects in breastfed infants.[8]

A cohort of 33 infants who were breastfed (extent not stated) by hospitalized mothers taking nifurtimox was followed in the Democratic Republic of the Congo. Thirty mothers took a full course of 30 doses of oral nifurtimox 15 mg/kg daily and all received 14 doses of intravenous eflornithine 400 mg/kg daily for 7 days for human African trypanosomiasis. (sleeping sickness). Eight mothers also took sulfadoxine-pyrimethamine. No serious adverse events were reported in any of the breastfed infants.[9,10]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Chloroquine, Mefloquine

### References

1 Chattopadhyay R, Mahajan B, Kumar S. (2007). Assessment of safety of the major antimalarial drugs. Expert Opin Drug Saf.
2 Peters PJ, Thigpen MC, Parise ME, et al. (2007). Safety and toxicity of sulfadoxine/pyrimethamine: implications for malaria prevention in pregnancy using intermittent preventive treatment. Drug Saf.
3 de Kock M, Tarning J, Barnes KI, et al. (2017). Response to "Lactation status and studies of pyrimethamine pharmacokinetics in pregnancy". CPT Pharmacometrics Syst Pharmacol.
4 Salman S, Davis TME. (2017). Regarding "Lactation status and studies of pyrimethamine pharmacokinetics in pregnancy". CPT Pharmacometrics Syst Pharmacol.
5 Clyde DF. (1957). An examination of factors involved in the transfer of pyrimethamine in human milk. East Afr Med J.
6 Clyde DF, Press J, Shute GT. (1956). Transfer of pyrimethamine in human milk. J Trop Med Hyg.
7 Clyde DF. (1960). Prolonged malaria prophylaxis through pyrimethamine in mothers' milk. East Afr Med J.
8 Semrau K, Kuhn L, Kasonde P, et al. (2006). Impact of chloroquine on viral load in breast milk. Trop Med Int Health.
9 Schmid C, Kuemmerle A, Blum J, et al. (2012). In-hospital safety in field conditions of nifurtimox eflornithine combination therapy (NECT) for T. b. gambiense sleeping sickness. PLoS Negl Trop Dis.
10 Kuemmerle A, Schmid C, Kande V, et al. (2020). Prescription of concomitant medications in patients treated with nifurtimox eflornithine combination therapy (NECT) for T.b. gambiense second stage sleeping sickness in the Democratic Republic of the Congo. PLoS Negl Trop Dis.

## Substance Identification

### Substance Name

Sulfadoxine and Pyrimethamine

### CAS Registry Number

37338-39-9

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents

Sulfonamides